# Naltrexone

CASRN: 16590-41-3

## Drug Levels and Effects

### Summary of Use during Lactation

Limited data indicate that naltrexone is minimally excreted into breastmilk. If the mother requires naltrexone, it is not a reason to discontinue breastfeeding.

### Drug Levels

Naltrexone is used as maintenance treatment of opiate dependence in opiate-detoxified patients. Peak plasma levels of 40 to 50 mcg/L at 1 hour after the dose and average plasma levels of 3 to 5 mcg/L have been reported in adults taking daily maintenance doses. Oral bioavailability is 5 to 40% in adults. Naltrexone is metabolized to active beta-naltrexol and to other inactive metabolites.

Maternal Levels. One lactating woman who was 1.5 months postpartum and taking 50 mg of oral naltrexone daily during pregnancy and lactation had her milk sampled several times between 3.7 and 23 hours after her dose. Naltrexone milk levels were undetectable (<2 mcg/L) by 8 hours after the dose while beta-naltrexol milk levels remained detectable throughout the study period and averaged 46 mcg/L. The half-life of elimination from milk was 2.5 and 7.7 hours for naltrexone and beta-naltrexol, respectively. The authors estimated that an exclusively breastfed infant would receive about 7 mcg/kg daily of naltrexone including the active metabolite, equivalent to 0.86% of the maternal weight-adjusted dosage.[1]

In a study of the pharmacokinetics of naltrexone in pregnant women, one mother had a milk sample analyzed for naltrexone and 6-beta-naltrexol 25 days after her last injection of long-acting naltrexone XR and 31 days postpartum. The naltrexone concentration was 9.58 mcg/L and the 6-beta-naltrexol concentration was 14.7 mcg/L. The molar sum of the two values indicated that the relative infant dose was 0.83% of the maternal dose.[2]

Infant Levels. A 1.5 month-old breastfed male infant of a mother who was taking 50 mg of oral naltrexone daily during pregnancy and lactation had undetectable (<2 mcg/L) plasma levels of both naltrexone and beta-naltrexol 9.5 hours after the maternal dose, 30 minutes after starting a feeding.[1]

In a study of the pharmacokinetics of naltrexone in pregnant women, a 31-day-old breastfed infant had a plasma sample analyzed for naltrexone and 6-beta-naltrexol 25 days after the mother’s last injection of long-acting naltrexone XR. The naltrexone concentration was 10.3 mcg/L and the 6-beta-naltrexol concentration was 15.8 mcg/L.[2]

### Effects in Breastfed Infants

A 1.5-month-old breastfed infant of a mother who was taking 50 mg of oral naltrexone daily during pregnancy and lactation was reportedly healthy with no naltrexone-related adverse effects.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Buprenorphine, Methadone

### References

1 Chan CF, Page-Sharp M, Kristensen JH, et al. Transfer of naltrexone and its metabolite 6,beta-naltrexol into human milk. J Hum Lact 2004;20:322–6.15296587
2 Iannella N, Momper J, Mirochnick M, et al. Pharmacokinetics of oral and extended-release naltrexone in pregnant and lactating individuals and their infants. J Addict Med 2026;20:62–9.40388713

## Substance Identification

### Substance Name

Naltrexone

### CAS Registry Number

16590-41-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Alcohol Deterrents

Narcotic Antagonists